# Galsulfase

CASRN: 552858-79-4

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of galsulfase during breastfeeding. Because it is a large protein molecule with a molecular weight of about 56,000 Da, the amount in milk is likely to be very low and absorption is unlikely because it is probably destroyed in the infant's gastrointestinal tract. If the mother requires galsulfase, it is not a reason to discontinue breastfeeding. Until more data are available, use galsulfase with infant careful monitoring during breastfeeding.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Galsulfase

### CAS Registry Number

552858-79-4

### Drug Class

Breast Feeding

Lactation

Milk, Human

Enzymes

Enzyme Replacement Therapy

Chondroitinsulfatases